# Febuxostat

CASRN: 144060-53-7

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the use of febuxostat during breastfeeding. Because febuxostat is more than 99% bound to plasma proteins, the amount in milk is likely to be low. Furthermore, oral bioavailability is only about 50%, so the amount an infant receives systemically is expected to be very small. If febuxostat is required by the mother, it is not a reason to discontinue breastfeeding; however, until more data become available, an alternate drug may be preferred.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Allopurinol, Probenecid

## Substance Identification

### Substance Name

Febuxostat

### CAS Registry Number

144060-53-7

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antigout Agents

Gout Suppressants